# Olopatadine

CASRN: 113806-05-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because absorption from the eye is limited, olopatadine would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cromolyn

## Substance Identification

### Substance Name

Olopatadine

### CAS Registry Number

113806-05-6

### Drug Class

- Breast Feeding
- Lactation
- Anti-Allergic Agents
- Antihistamines